# Acetaminophen

CASRN: 103-90-2

## Drug Levels and Effects

### Summary of Use during Lactation

Acetaminophen is a good choice for analgesia, and fever reduction in nursing mothers. Giving acetaminophen and ibuprofen on a fixed schedule for 24 hours after vaginal delivery appears to increase the breastfeeding rate. There is no difference in breastfeeding initiation rate between ibuprofen or acetaminophen alone after vaginal delivery. Amounts in milk are much less than doses usually given to infants. Adverse effects in breastfed infants appear to be rare.

### Drug Levels

Maternal Levels. A single oral dose of 650 mg of acetaminophen was given to 12 nursing mothers who were 2 to 22 months postpartum. Peak milk levels of 10 to 15 mg/L occurred between 1 and 2 hours after the dose in all patients. Acetaminophen was undetectable (<0.5 mg/L) in all mothers 12 hours after the dose. The authors calculated that an infant who ingested 90 mL of breastmilk every 3 hours would receive an average of 0.88 mg of acetaminophen or 0.14% (range 0.04 to 0.23%) of the mother's absolute dosage.[1] Using data from this study, an infant would receive a maximum of about 2% of the maternal weight-adjusted dosage.

Three women took a single 500 mg dose of acetaminophen. Peak milk levels averaging 4.2 mg/L occurred within 2 hours after the dose.[2] Using data from this study, an infant would receive a maximum of about 3.6% of the maternal weight-adjusted dosage.

Four women who were 2 to 8 months postpartum were given a single 1 gram dose of acetaminophen. Milk was completely emptied from one breast every 30 minutes for 3 to 3.5 hours, with a final sample from the opposite breast. Peak milk levels occurred between 1 and 2.5 hours after the dose. The acetaminophen level in the breast that was sampled only once had a lower level than the breast sampled at half-hour intervals. The authors estimated that a breastfed infant would receive an average of 1.1% and a maximum of 1.8% of the maternal weight-adjusted dosage. This dose is about 0.5% of the lowest recommended infant dose of acetaminophen.[3]

Eighteen women taking acetaminophen 500 mg orally postpartum pain donated a total of 20 milk samples for analysis at random times at 5 to 6 days postpartum. Milk concentrations ranged from 2.5 mcg/L at 68 hours after a dose to 13.5 mg/L at 0.8 hours after a dose. Levels were generally lower with increased time after a dose.[4] Note that this paper does not state the number of doses taken prior to sampling, so steady-state was not guaranteed. The pharmacokinetic analysis of samples was performed in an invalid way, and pharmacokinetic parameters reported in the paper are therefore not valid.

Infant Levels. No acetaminophen was detected in the urine of 12 breastfed infants aged 2 to 22 months after maternal ingestion of 650 mg of acetaminophen.[1]

Urine was collected for 1 to 3.5 hours after nursing in 6 infants aged 2 to 6 days whose mothers received 1 to 2 grams of acetaminophen 2 to 4 hours before nursing their infant. Infants excreted an average of 401 mcg of acetaminophen and its metabolites in urine during the collection interval. These neonates excreted a greater percentage of drug as acetaminophen and much less as the sulfate metabolite than in an adult comparison population.[3]

### Effects in Breastfed Infants

A maculopapular rash on the upper trunk and face of a 2-month-old infant was probably caused by acetaminophen in breastmilk. The rash occurred after 2 days of therapy in the mother at a dose of 1 gram at bedtime. It subsided when the drug was discontinued and recurred 2 weeks later after another acetaminophen dose of 1 gram was taken by the mother.[5]

Two papers report 14 women who breastfed after taking acetaminophen or its prodrug phenacetin with no adverse effects to their infants.[6,7]

In a telephone follow-up study, mothers reported no side effects among 43 infants exposed to acetaminophen in breastmilk.[8]

Two clinicians speculated that breastmilk exposure to acetaminophen during breastfeeding might be a risk factor for asthma and wheezing in the breastfed infants based on their personal observations.[9] However, these observations were uncontrolled and cannot be considered to be valid proof of an association.[10]

### Effects on Lactation and Breastmilk

A randomized study compared the use of ibuprofen 400 mg plus acetaminophen 1 gram every 6 hours for 24 hours to the same combination on demand after normal vaginal delivery. Women who received the analgesics on a fixed schedule were more likely to breastfeed their baby (98% vs 88%) than those receiving analgesics on demand, even though their average pain scores were not different.[11]

A double-blind study compared acetaminophen 1000 mg to ibuprofen for pain control after vaginal delivery. No difference was seen between the two treatments in the percentage of mothers who initiated breastfeeding of their infants.[12]

### Alternate Drugs to Consider

Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

### References

1 Berlin CM, Jr, Yaffe SJ, Ragni M. Disposition of acetaminophen in milk, saliva and plasma of lactating women. Pediatr Pharmacol (New York) 1980;1:135–41.7202185
2 Bitzén PO, Gustafsson B, Jostell KG, et al. Excretion of paracetamol in human breast milk. Eur J Clin Pharmacol 1981;20:123–5.7262173
3 Notarianni LJ, Oldham HG, Bennett PN. Passage of paracetamol into breast milk and its subsequent metabolism by the neonate. Br J Clin Pharmacol 1987;24:63–7.3620287
4 Tamaki R, Noshiro K, Furugen A, et al. Breast milk concentrations of acetaminophen and diclofenac - unexpectedly high mammary transfer of the general-purpose drug acetaminophen. BMC Pregnancy Childbirth 2024;24:90.38287321
5 Matheson I, Lunde PKM, Notarianni L. Infant rash caused by paracetamol in breast milk? Pediatrics 1985;76:651–2.2931668
6 Berlin CM, Jr, Yaffe SJ, Ragni M. Disposition of acetaminophen in milk, saliva and plasma of lactating women. Pediatr Pharmacol 1980;1:135–41.7202185
7 Findlay JW, DeAngelis RL, Kearney MF, et al. Analgesic drugs in breast milk and plasma. Clin Pharmacol Ther 1981;29:625–33.7214793
8 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393–9.8498418
9 Verd S, Nadal-Amat J. Paracetamol and asthma and lactation. Acta Paediatr 2011;100:e2–3.21244486
10 Bakkeheim E, Carlsen KH, Lodrup Carlsen, KC. Paracetamol exposure during breastfeeding and risk of allergic disease. Acta Paediatr 2011;100:e3. doi:10.1111/j.1651-2227.2011.02340.x
11 Bachar G, Alter A, Justman N, et al. Fixed-time interval vs on-demand oral analgesia after vaginal delivery: A randomized controlled trial. Am J Obstet Gynecol MFM 2024;6:101372.38583715
12 Ram S, Madar D, Ram HS, et al. Paracetamol versus ibuprofen for early postpartum pain control: A randomized controlled trial. Arch Gynecol Obstet 2025;12:51–7.39499309

## Substance Identification

### Substance Name

Acetaminophen

### CAS Registry Number

103-90-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Non-Narcotic